# Revefenacin

CASRN: 864750-70-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of revefenacin during breastfeeding. Because the drug is only 3% absorbed orally, it is unlikely to affect the breastfed infant. Long-term use of revefenacin might reduce milk production or milk letdown. During long-term use, observe for signs of decreased lactation (e.g., insatiety, poor weight gain).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aclidinium, Tiotropium, Umeclidinium

## Substance Identification

### Substance Name

Revefenacin

### CAS Registry Number

864750-70-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Parasympatholytics

Muscarinic Antagonists

Bronchodilator Agents